# Salsalate

CASRN: 552-94-3

## Drug Levels and Effects

### Summary of Use during Lactation

Salsalate has not been studied during breastfeeding, but salsalate results in salicylic acid in the blood. Salicylic acid and aspirin have been studied during breastfeeding. The excretion of salicylate into breastmilk increases disproportionately as the maternal dosage increases. Long-term, high-dose maternal aspirin ingestion probably caused metabolic acidosis in one breastfed infant. Reye’s syndrome is associated with aspirin administration to infants with viral infections, but the risk of Reye’s syndrome from salicylate in breastmilk is unknown. An alternate drug is preferred over salsalate.

### Drug Levels

Milk levels have not been measured after maternal ingestion of salsalate, but have been measured after other salicylates, such as aspirin and sodium salicylate. All of these products result in salicylic acid in the blood and milk; however, some studies have not measured salicylate metabolites in breastmilk that may be hydrolyzed in the infant’s gut and absorbed as salicylate.[1]

Maternal Levels. Milk and blood levels of the salicylate metabolites of aspirin were determined in 8 lactating women following oral administration of 1 gram of aspirin. Peak salicylic acid milk levels averaging 2.4 mg/L occurred 3 hours after the dose. Milk contents of salicyluric acid were greater than those of salicylic acid; a mean peak level of 10.2 mg/L was reached after 9 hours, and averaged 4.4 mg/L 24 hours after the dose. Total salicylate and metabolite levels were 5.1 mg/L at 3 hours, 9.9 mg/L at 6 hours, 11.2 mg/L at 9 hours and 10.2 mg/L at 12 hours after the dose. Acid labile conjugates were less than 0.2 mg/L.[2] Using an average salicylate plus salicylurate level over the first 12 hours, a fully breastfed infant would receive an average of 9.4% of the maternal weight-adjusted dosage.

Six nursing mothers who were 2 to 8 months postpartum (average 5 months) were given aspirin doses of 500, 1000 and 1500 mg of aspirin orally on 3 separate occasions. Peak breastmilk salicylate levels were 5.8 mg/L, 15.8 mg/L, and 38.8 mg/L, respectively. Salicylate metabolites were not measured. The time of the peak salicylate levels occurred between 2 and 6 hours after ingestion, with little variation in levels over time. The disproportionate increase in milk levels as the dose increased was attributed to nonlinear metabolism and protein binding.[3]

Two women given aspirin 454 mg orally had peak salicylate milk levels of about 1 mg/L 1 hour after the dose. The authors estimated that about 0.1% of the mothers’ total dose would appear in breastmilk in 48 hours.[4] However, salicylate metabolites were not measured in milk.

A woman who was breastfeeding a 4-month-old was taking long-term aspirin therapy in dosages ranging from 2 to 5.9 grams daily. During this therapy, milk was obtained 4 hours after a 650 mg dose and just before taking a dose of 975 mg. The trough milk salicylate level was 2 mg/L, and a peak level of 10 mg/L occurred 3 hours after the dose. Salicylate levels ranged from 4 to 7 mg/L over the 5 hours after the peak.[5] Using the peak level from this study, a fully breastfed infant would receive about 10% of the maternal weight-adjusted dosage of salicylate. The assay method used should have measured both salicylate and metabolites in milk.

Infant Levels. Four nursing mothers were given oral sodium salicylate in a dose of 20 mg/kg. Their exclusively breastfed infants ranged from 23 to 43 days of age. The infants’ urine was collected until salicylate excretion was complete and found to contain 0.18 to 0.36% of the maternal dose, primarily as salicyluric acid.[1]

A 9-week-old infant who was born at 36 weeks gestation was receiving about 50% breastmilk and 50% formula. The infant’s mother was taking 2.4 grams of aspirin daily and the infant’s serum contained 65 mg/L of salicylate.[6]

### Effects in Breastfed Infants

A 16-day-old breastfed infant developed metabolic acidosis with a salicylate serum level of 240 mg/L and salicylate metabolites in the urine. The mother was taking 3.9 grams daily of aspirin for arthritis, and salicylate in breastmilk probably caused the infant’s illness, but the possibility of direct administration to the infant could not be ruled out.[7]

Thrombocytopenia, fever, anorexia and petechiae occurred in a 5-month-old breastfed infant 5 days after her mother started taking aspirin for fever. One week after recovery, the infant was given a single dose of aspirin 125 mg and the platelet count dropped once again. The original symptoms were probably caused by salicylate in breastmilk.[8]

Hemolysis after aspirin and phenacetin taken by the mother of a 23-day-old, glucose-6-phosphate dehydrogenase (G6PD) deficient infant was possibly due to aspirin in breastmilk.[9]

In a telephone follow-up study, mothers reported no side effects among 15 infants exposed to aspirin (dose and infant age unspecified) in breastmilk.[10]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acetaminophen, Celecoxib, Diclofenac, Flurbiprofen, Ibuprofen, Indomethacin, Naproxen, Piroxicam

### References

1 Levy G. Salicylate pharmacokinetics in the human neonate. In: Morselli P, Garattini S, Sereni F, eds. Basic and therapeutic aspects of perinatal pharmacology. New York: Raven Press; 1975:319–30.
2 Pütter J, Satravaha P, Stockhausen H. Quantitative analysis of the main metabolites of acetylsalicylic acid. Comparative analysis in the blood and milk of lactating women. Z Geburtshilfe Perinatol 1974;178:135–8.4422623
3 Jamali F, Keshavarz E. Salicylate excretion in breast milk. Int J Pharm 1981;8:285–90. doi:10.1016/0378-5173(81)90068-5
4 Findlay JW, DeAngelis RL, Kearney MF, . Analgesic drugs in breast milk and plasma. Clin Pharmacol Ther 1981;29:625–33.7214793
5 Bailey DN, Welbert RT, Naylor A. A study of salicylate and caffeine excretion in the breast milk of two nursing mothers. J Anal Toxicol 1982;6:64–8.7098450
6 Unsworth J, d’Assis-Fonseca A, Beswick DT. Serum salicylate levels in a breast fed infant. Ann Rheum Dis 1987;46:638–9.3662653
7 Clark JH, Wilson WG. A 16-day-old breast-fed infant with metabolic acidosis caused by salicylate. Clin Pediatr (Phila) 1981;20:53–4.7449246
8 Terragna A, Spirito L. Thrombocytopenic purpura in an infant after administration of acetylsalicylic acid to the wet-nurse. Minerva Pediatr 1967;19:613–6.6069440
9 Harley JD, Robin H. “Late” neonatal jaundice in infants with glucose-6-phosphate dehydrogenase-deficient erythrocytes. Australas Ann Med 1962;11:148–55.13960788
10 Ito S, Blajchman A, Stephenson M, . Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol 1993;168:1393–9.8498418

## Substance Identification

### Substance Name

Salsalate

### CAS Registry Number

552-94-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesic Agents

Anti-inflammatory Agents, Nonsteroidal